# Isoetharine

CASRN: 530-08-5

## Drug Levels and Effects

### Summary of Use during Lactation

Isoetharine is no longer marketed in the US. Although no published data exist on the use of isoetharine during lactation, data from the related drug, terbutaline, indicate that very little is expected to be excreted into breastmilk.[1-3] The authors of several reviews and an expert panel agree that use of inhaled bronchodilators is acceptable during breastfeeding because of the low bioavailability and maternal serum levels after use.[4-7]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Terbutaline

### References

1 Boréus LO, de Château P, Lindberg C, Nyberg L. Terbutaline in breast milk. Br J Clin Pharmacol 1982;13:731-2.7082542
2 Lindberg C, Boréus LO, de Château P, et al. Transfer of terbutaline into breast milk. Eur J Respir Dis Suppl 1984;134:87-91.6586490
3 Lönnerholm G, Lindström B. Terbutaline excretion into breast milk. Br J Clin Pharmacol 1982;13:729-30.7082541
4 McDonald CF, Burdon JGW. Asthma in pregnancy and lactation. A position paper for the Thoracic Society of Australia and New Zealand. Med J Aust 1996;165:485-8.8937369
5 Nelson-Piercy C. Asthma in pregnancy. Thorax 2001;56:325-8.11254828
6 Taddio A, Ito S. Drugs and breast-feeding. In, Koren G, ed. Maternal-fetal toxicology. A clinician's guide. 3rd ed. New York. Marcel Dekker. 2001:177-32.
7 National Heart, Lung, and Blood, Institute, National Asthma, Education, and, Prevention, Program, Asthma, and, Pregnancy, Working, Group. NAEPP expert panel report. Managing asthma during pregnancy: recommendations for pharmacologic treatment-2004 update. J Allergy Clin Immunol 2005;115:34-46.15637545

## Substance Identification

### Substance Name

Isoetharine

### CAS Registry Number

530-08-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Asthmatic Agents

Bronchodilator Agents

Beta Adrenergic Agonists